# Rezafungin

CASRN: 1396640-59-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of rezafungin during breastfeeding. Because rezafungin is about 90% bound to plasma proteins and has poor oral bioavailability, it is unlikely to reach the milk and be absorbed by the infant. If rezafungin is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

## Substance Identification

### Substance Name

Rezafungin

### CAS Registry Number

1396640-59-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Echinocandins